# Ergonovine

CASRN: 60-79-7

## Drug Levels and Effects

### Summary of Use during Lactation

Ergonovine is no longer marketed in the United States. Ergonovine given in the immediate postpartum period lowers serum basal prolactin and suckling-induced prolactin possibly increases. However, the prolactin level in a mother with established lactation may not affect her ability to breastfeed. Ergonovine appears to decrease the rate of breastfeeding. Ergonovine is probably best avoided in mothers who wish to nurse, relying instead on suckling-induced oxytocin release to hasten uterine involution.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

In one study, a single oral dose of ergonovine maleate 0.2 mg in 12 nonbreastfeeding women on day 3 postpartum caused a 10 to 20% drop in average serum prolactin levels between 0.5 and 2.5 hours after the dose. The authors expressed concern that repeated doses of ergonovine could suppress lactation.[1]

Ten women who were given ergonovine 0.2 mg 3 times daily from day 1 to 7 postpartum were compared to 6 women who did not receive the drug. None of the women breastfed their infants. Serum prolactin levels were significantly lower in the treated women by day 2 postpartum and persisted through the 7 days of the study. Seven of the 10 treated women developed breast engorgement and had milk letdown and 3 had progressive inhibition of lactation. In 2 additional women who were nursing their infants, a single dose of 0.2 mg of ergonovine intravenously blunted the response of serum prolactin to suckling.[2]

In a nonrandomized study, 11 women with normal deliveries were given an intramuscular injection of either oxytocin 5 units plus ergonovine 0.5 mg (n = 5) or 5 units of oxytocin alone (n = 6). Serum prolactin levels were lower in the women given ergonovine from 0.5 to 2.5 hours.[3]

In a randomized, but nonblinded, controlled trial, women thought to be at low risk of postpartum hemorrhage were given either ergonovine 0.5 mg intravenously following birth of the infant (n = 197) or no drug (n = 135). Serum prolactin levels obtained in the period of 48 to 72 hours postpartum did not differ between the groups, but fewer of those who received ergonovine were still breastfeeding at 4 weeks postpartum than those who did not.[4]

A retrospective review of obstetrical records of 18,165 records of mothers giving birth in Wales found that use of intravenous or intramuscular ergonovine during the third stage of labor as a uterotonic reduced the odds of the mother breastfeeding at 48 hours postpartum. The reduction was 36% in the overall sample and 49% for primiparous mothers.[5]

### Alternate Drugs to Consider

Methylergonovine

### References

1 Shane JM, Naftolin F. Effect of ergonovine maleate on puerperal prolactin. Am J Obstet Gynecol 1974;120:129-31.4602154
2 Canales ES, Garrido JT, Zarate A, et al. Effect of ergonovine on prolactin secretion and milk let-down. Obstet Gynecol 1976;48:228-9.940657
3 Symes JB. A study on the effect of ergometrine on serum prolactin levels following delivery. J Obstet Gynaecol 1984;5:36-8.
4 Begley CM. The effect of ergometrine on breast feeding. Midwifery 1990;6:60-72.2195299
5 Jordan S, Emery S, Watkins A, et al. Associations of drugs routinely given in labour with breastfeeding at 48 hours: Analysis of the Cardiff births survey. BJOG 2009;116:1622-9.19735379

## Substance Identification

### Substance Name

Ergonovine

### CAS Registry Number

60-79-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Ergot Alkaloids

Oxytocics